# Iobenguane I 131

CASRN: 77679-27-7

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of iobenguane I 131 (I 131 meta-iodobenzylguanidine; I 131 MIBG) as a diagnostic agent. International agencies state that breastfeeding should be interrupted for more than 3 weeks following diagnostic use of I 131 MIBG.[1,2]After therapeutic dosages, the manufacturer recommends that breastfeeding should be withheld for 80 days after the final dose. These times usually result in permanent discontinuation of breastfeeding for this infant, and cessation of breastfeeding for the current infant is recommended by most experts.[3-6] Patients receiving iobenguane I 131usually receive potassium iodide prior to the diagnostic examination to block their thyroid glands’ uptake of the I-131 that is released from the I 131 MIBG. Iodide may interfere with the infant’s thyroid function.

Nursing mothers should not work with substances containing I 131 in their workplace.[7]

### Drug Levels

I 131 is a beta and high-energy gamma emitter with a main gamma emission energy of 364 keV and a physical half-life of 8.04 days.[8] Iodide is actively secreted into breastmilk and actively taken up by the mother's and infant's thyroid glands.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):7-321.
2 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
3 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):319-21.
4 Bombardieri E, Giammarile F, Aktolun C, et al. 131I/123I-metaiodobenzylguanidine (mIBG) scintigraphy: Procedure guidelines for tumour imaging. Eur J Nucl Med Mol Imaging 2010;37:2436-46.20644928
5 International Atomic Energy Agency. Radiation Protection and Safety in Medical Uses of Ionizing Radiation, IAEA Safety Standards Series No. SSG-46, IAEA, Vienna. 2018. https://www.iaea.org/publications/11102/radiation-protection-and-safety-in-medical-uses-of-ionizing-radiation
6 Taieb D, Hicks RJ, Hindie E, et al. European Association of Nuclear Medicine Practice Guideline/Society of Nuclear Medicine and Molecular Imaging Procedure Standard 2019 for radionuclide imaging of phaeochromocytoma and paraganglioma. Eur J Nucl Med Mol Imaging 2019;46:2112-37.31254038
7 Almén A, Mattsson S. Radiological protection of foetuses and breast-fed children of occupationally exposed women in nuclear medicine - Challenges for hospitals. Phys Med 2017;43:172-7.28882410
8 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf

## Substance Identification

### Substance Name

Iobenguane I 131

### CAS Registry Number

77679-27-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Iodine Radioisotopes

Diagnostic Agents